# Crotalidae Polyvalent Immune Fab

## Drug Levels and Effects

### Summary of Use during Lactation

Crotalidae polyvalent immune Fab is used to treat crotalid envenomation (rattlesnakes, copperheads, cottonmouths, water moccasins). No information is available on the clinical use of crotalidae polyvalent immune Fab during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Crotalidae Polyvalent Immune Fab

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antivenins